# Nefazodone

CASRN: 83366-66-9

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that usual doses of nefazodone produce low but variable levels in milk that would not be expected to cause adverse effects in a breastfed infant, especially if the infant is older than 2 months. However, adverse effects in a breastfed preterm infant have been reported. If nefazodone is required by the mother of an older infant, it is not a reason to discontinue breastfeeding, but until more data become available, other drugs may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Nefazodone is metabolized to 4 metabolites, but only hydroxynefazodone is thought to be active as an antidepressant. Its antidepressant activity is considered to be equal to that of nefazodone.[1]

Maternal Levels. The trough milk levels of nefazodone and its metabolites were measured 10 to 15 hours after the previous dose in 3 women who had been taking nefazodone for at least 3 weeks. Dosages were 200 mg twice daily, 50 mg twice daily, and for the third, 50 mg in the morning and 100 mg in the evening. Milk nefazodone levels were 57, 687, and 213 mcg/L, respectively; milk hydroxynefazodone was not quantifiable (<50 mcg/L) in the first 2 mothers and 104 mcg/L in the third.[2] Using the trough milk level data, the estimated minimum intake of these infants would be 0.24, 6.2 and 2% of the maternal weight-adjusted dosage of nefazodone and its active metabolite.

In another paper by the same authors, it appears that 2 of the above mothers were studied again in more detail. One mother who was 21 weeks postpartum had been taking nefazodone 50 mg in the morning and 100 mg in the evening for 6 days. The other mother who was 4 weeks postpartum had been taking nefazodone 200 mg twice daily for 7 months. Four or 5 milk levels were analyzed for drug and metabolites, but values do not appear in the published paper. No metabolites appeared in the milk of the first mother; only nefazodone and hydroxynefazodone were found in the milk of the second mother. The authors estimated that the first infant would receive 0.28 mg/kg daily or 0.4% of the maternal weight-adjusted dosage and the second would receive 0.54 mg/kg daily or 2.2% of the maternal weight-adjusted dosage.[3]

A woman was taking nefazodone 200 mg in the morning and 100 mg in the evening. The highest milk levels of nefazodone occurred 1 to 3 hours after the morning dose, with the highest level of 358 mcg/L occurring 3 hours after the dose. Hydroxynefazodone levels were consistently much lower with a peak level of 32 mcg/L at 2 hours after the dose. The authors estimated that an exclusively breastfed infant would receive 0.34% of the maternal weight-adjusted dosage of nefazodone and its active metabolite with this maternal dosage regimen. Two inactive metabolites would contribute an additional 0.11% of maternal dosage.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Drowsiness, lethargy, poor feeding and low body temperature occurred in a 2.1 kg breastfed 9-week-old infant who was born preterm at 27 weeks to a mother taking a dose of 300 mg of nefazodone daily. The symptoms were probably caused by nefazodone in breastmilk.[4]

### Effects on Lactation and Breastmilk

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[5] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[6] None of the mothers were taking nefazodone.

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[7]

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

### References

1 Weissman AM, Levy BT, Hartz AJ, et al. Pooled analysis of antidepressant levels in lactating mothers, breast milk, and nursing infants. Am J Psychiatry 2004;161:1066-78.15169695
2 Dodd S, Buist A, Burrows GD, et al. Determination of nefazodone and its pharmacologically active metabolites in human blood and breast milk by high-performance liquid chromatography. J Chromatogr B Biomed Sci Appl 1999;730:249-55.10448960
3 Dodd S, Maguire KP, Burrows GD, Norman TR. Nefazodone in the breast milk of nursing mothers: A report of two patients. J Clin Psychopharmacol 2000;20:717-8.11106156
4 Yapp P, Ilett KF, Kristensen JH, et al. Drowsiness and poor feeding in a breast-fed infant: Association with nefazodone and its metabolites. Ann Pharmacother 2000;34:1269-72.11098340
5 Venkatesh KK, Castro VM, Perlis RH, Kaimal AJ. Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol 2017;37:1003-9.28682318
6 Leggett C, Costi L, Morrison JL, et al. Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact 2017;33:701-9.28984528
7 Grzeskowiak LE, Saha MR, Nordeng H, et al. Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand 2022;101:344-54.35170756

## Substance Identification

### Substance Name

Nefazodone

### CAS Registry Number

83366-66-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Serotonin and Noradrenaline Reuptake Inhibitors